# Famotidine

CASRN: 76824-35-6

## Drug Levels and Effects

### Summary of Use during Lactation

Famotidine doses in breastmilk result in infant dosages that are lower than those used in newborn infants. Famotidine would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Eight women who had "recently given birth" (not defined, but apparently within a few days postpartum) were given famotidine 40 mg orally. An average peak breastmilk level of 72 mcg/L occurred 6 hours after the dose.[1] Using the peak milk level data from this study, an exclusively breastfed infant would receive an estimated maximum of 0.01 mg/kg daily with this maternal dosage regimen or less than 2% of the maternal weight-adjusted dosage.

Seven women were given oral famotidine 40 mg daily in 2 or 4 divided doses for 3 days at 12 to 16 weeks postpartum. Average concentrations of famotidine in breastmilk were 53 and 55 mcg/L at 3 and 6 hours after a dose, respectively.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Histamine H2-receptor blockade is known to stimulate prolactin secretion.[3] Oral famotidine usually does not affect serum prolactin levels, but rare cases of hyperprolactinemia and galactorrhea have been reported.[4,5] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Antacids, Cimetidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Courtney TP, Shaw RW, Cedar E, et al. Excretion of famotidine in breast milk. Br J Clin Pharmacol 1988;26:615p-78p.
2 Wang X, Zhan Y, Hankins GD, et al. Pharmacokinetics of famotidine in pregnant women. Am J Obstet Gynecol 2011;204 (1 Suppl) :S72-3.20889136
3 Knigge UP. Histaminergic regulation of prolactin secretion. Dan Med Bull 1990;37:109-24.2188799
4 Delpre G, Lapidot M, Lipchitz A, et al. Hyperprolactinaemia during famotidine therapy. Lancet 1993;342:868.8104296
5 Güven K, Kelestimur F. Hyperprolactinemia and galactorrhea with standard-dose famotidine therapy. Ann Pharmacother 1995;29:788.8520102

## Substance Identification

### Substance Name

Famotidine

### CAS Registry Number

76824-35-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Histamine H2 Antagonists

Gastrointestinal Agents